# Retifanlimab

CASRN: 2079108-44-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of retifanlimab during breastfeeding. Because retifanlimab is a large protein molecule with a molecular weight of 148,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1] The manufacturer recommends avoiding breastfeeding during therapy and for 4 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Krysko KM, Dobson R, Alroughani R, et al. (2023). Family planning considerations in people with multiple sclerosis. Lancet Neurol.

## Substance Identification

### Substance Name

Retifanlimab

### CAS Registry Number

2079108-44-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents